# Resmetirom

CASRN: 920509-32-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of resmetirom during breastfeeding. Because it is over 99% bound to plasma proteins, the amount is milk is likely to be very low. If a mother requires resmetirom, it is not a reason to discontinue breastfeeding. Until more data become available, resmetirom should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Monitor the breastfed infant for vomiting, jaundice, fever, and rash.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Resmetirom

### CAS Registry Number

920509-32-6

### Drug Class

Breast Feeding

Lactation

Milk, Human